# Levamisole

CASRN: 14769-73-4

## Drug Levels and Effects

### Summary of Use during Lactation

Levamisole is no longer marketed for human use in the United States because can cause agranulocytosis, but it is used as an anthelmintic in other countries. No published information is available about its excretion into breastmilk. Some information indicates that maternal use may be acceptable during breastfeeding. However, because there is little published experience with levamisole during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The World Health Organization recommends against breastfeeding with maternal levamisole therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cohort of 33 infants who were breastfed (extent not stated) by hospitalized mothers taking nifurtimox was followed in the Democratic Republic of the Congo. Thirty mothers took a full course of 30 doses of oral nifurtimox 15 mg/kg daily and all received 14 doses of intravenous eflornithine 400 mg/kg daily for 7 days for human African trypanosomiasis. (sleeping sickness). Six nursing mothers also took levamisole. No serious adverse events were reported in any of the breastfed infants.[1,2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Schmid C, Kuemmerle A, Blum J, et al. (2012). In-hospital safety in field conditions of nifurtimox eflornithine combination therapy (NECT) for T. b. gambiense sleeping sickness. PLoS Negl Trop Dis.
2 Kuemmerle A, Schmid C, Kande V, et al. (2020). Prescription of concomitant medications in patients treated with nifurtimox eflornithine combination therapy (NECT) for T.b. gambiense second stage sleeping sickness in the Democratic Republic of the Congo. PLoS Negl Trop Dis.

## Substance Identification

### Substance Name

levamisole

### CAS Registry Number

14769-73-4

### Drug Class

Breast Feeding

Lactation